# Sulfur Hexafluoride

CASRN: 2551-62-4

## Drug Levels and Effects

### Summary of Use during Lactation

No published experience exists with the use of sulfur hexafluoride during breastfeeding. The half-life of the agent is about 10 minutes and absorption of the drug by the infant is unlikely. If sulfur hexafluoride is required by the mother, it is not a reason to discontinue breastfeeding.[1] Because of the lack of information, the American College of Radiology states that temporary (~24 hours) pumping and discarding of milk may be considered.[2,3]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Cova MA, Stacul F, Quaranta R, et al. Radiological contrast media in the breastfeeding woman: A position paper of the Italian Society of Radiology (SIRM), the Italian Society of Paediatrics (SIP), the Italian Society of Neonatology (SIN) and the Task Force on Breastfeeding, Ministry of Health, Italy. Eur Radiol 2014;24:2012-22 24838733
2 American College of Radiology Committee on Drugs and Contrast Media. Administration of contrast media to breast-feeding mothers. In, ACR manual on contrast media. 2023;Version 2023:120-1. https://www.acr.org/Clinical-Resources/Contrast-Manual
3 Bookwalter CA, McDonald RJ, Packard AT, et al. Contrast media in pregnant and lactating patients, from the AJR special series on contrast media. AJR Am J Roentgenol 2024;224:e2431415 39046138

## Substance Identification

### Substance Name

Sulfur Hexafluoride

### CAS Registry Number

2551-62-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Contrast Media

Diagnostic Agents

Fluorides

Gases